# Rifaximin

CASRN: 88747-56-2

## Drug Levels and Effects

### Summary of Use during Lactation

Rifaximin is poorly absorbed orally and used only for gastrointestinal infections. It is not likely to reach the breastmilk or bloodstream of the infant or cause any adverse effects in breastfed infants after maternal use. However, no published experience exists with rifaximin during breastfeeding; therefore, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Rifaximin

### CAS Registry Number

88747-56-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Gastrointestinal Agents

Rifamycins